# C1 Esterase Inhibitor

CASRN: 80295-38-1

## Drug Levels and Effects

### Summary of Use during Lactation

C1 esterase inhibitor [human] is a serine proteinase inhibitor derived from human plasma that is used in treating hereditary angioedema. Breastmilk levels of C1 esterase inhibitor have not been measured after exogenous administration in humans. Because of its large molecular weight, amounts in milk are expected to be small. Any C1 esterase inhibitor in breastmilk is probably destroyed in the infant's gastrointestinal tract and not absorbed, except perhaps in neonates. Various international consensus panels state that human plasma-derived C1 esterase inhibitor is considered to be the therapy of choice for both treatment and short- and long-term prophylaxis of maternal hereditary angioedema during lactation. Recombinant human C1 esterase inhibitor is a valid alternative.[1-6] A patient with Factor XII hereditary angioedema was also successfully treated with subcutaneous C1 esterase inhibitor during pregnancy and lactation.[7]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Three patients with hereditary angioedema received C1 esterase inhibitor concentrate on 12 occasions to relieve abdominal edematous episodes during breastfeeding. No adverse reactions were reported.[8]

In a case series spanning 12 years, 21 mothers with hereditary angioedema breastfed their infants for a median duration of 4.8 months (range 1 to 34 months) while receiving C1 esterase inhibitor concentrate as needed. No side effects occurred in the breastfed infants.[9]

A pregnant woman with severe hereditary angioedema required 500 IU of C1 inhibitor concentrate every 2 days to maintain her pregnancy. Postpartum, she received 500 IU on demand while breastfeeding. She used 88 vitals during her 6-month breastfeeding (extent not stated) period. No side effects or viral transmission were reported and or virus anti-C1-INH antibodies were not detected.[10]

A woman with hereditary angioedema received C1 inhibitor concentrate 1000 units every week during pregnancy. Postpartum she used 500 units as needed. She and her breastfed infant were reportedly healthy.[11]

A woman with hereditary angioedema used subcutaneous C1 esterase inhibitor concentrate 1500 units prophylactically twice a week during pregnancy and postpartum. At 7 weeks postpartum she was able to decrease the frequency to once weekly for 7 weeks, but then increased the frequency to twice weekly until almost 10 months postpartum. During this time, she breastfed her infant although the extent and duration were not stated. There was no mention of any adverse effects in her infant.[12]

A 29-year-old woman with a long history of hereditary angioedema received subcutaneous C1-esterase therapy during pregnancy and postpartum in a dose of “2 x 3000 IU/week” (presumably 3000 IU twice weekly). She breastfed her infant, but the extent and duration of breastfeeding was not specified. The authors reported that the infant experienced no adverse reactions.[13]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Caballero T, Farkas H, Bouillet L, et al. International consensus and practical guidelines on the gynecologic and obstetric management of female patients with hereditary angioedema caused by C1 inhibitor deficiency. J Allergy Clin Immunol 2012;129:308–20.22197274
2 Maurer M, Magerl M, Betschel S, et al. The international WAO/EAACI guideline for the management of hereditary angioedema-The 2021 revision and update. Allergy 2022;77:1961–90.35006617
3 Busse PJ, Christiansen SC, Riedl MA, et al. US HAEA Medical Advisory Board 2020 guidelines for the management of hereditary angioedema. J Allergy Clin Immunol Pract 2021;9:132–50.e3.32898710
4 Yeich A, Elhatw A, Ashoor Z, et al. Safety of medications for hereditary angioedema during pregnancy and lactation. Expert Opin Drug Saf 2023;22:17–24.36744397
5 Betschel S, Binkley K, Borici-Mazi R, et al. The International/Canadian hereditary angioedema guideline. Allergy Asthma Clin Immunol 2026;22:24.41606636
6 Vázquez DO, Giavina-Bianchi P, Josviack D, et al. The 2025 WAO Guidelines for the classification, diagnosis, and treatment of hereditary angioedema, with consideration of worldwide disparities. World Allergy Organ J 2026;19:101335.42165046
7 Herraez L, Sala PÁ, Mielgo R. Subcutaneous plasma derived C1 inhibitor for long-term prophylaxis during pregnancy and breastfeeding in a patient with Factor XII hereditary angioedema. J Allergy Clin Immunol Pract 2023;11:2587–8.37121510
8 Czaller I, Visy B, Csuka D, et al. The natural history of hereditary angioedema and the impact of treatment with human C1-inhibitor concentrate during pregnancy: A long-term survey. Eur J Obstet Gynecol Reprod Biol 2010;152:44–9.20541309
9 Martínez-Saguer I, Rusicke E, Aygoren-Pursun E, et al. Characterization of acute hereditary angioedema attacks during pregnancy and breast-feeding and their treatment with C1 inhibitor concentrate. Am J Obstet Gynecol 2010;203:131.e1–7.20471627
10 Farkas H, Csuka D, Toth F, et al. Successful pregnancy outcome after treatment with C1-inhibitor concentrate in a patient with hereditary angioedema and a history of four miscarriages. Eur J Obstet Gynecol Reprod Biol 2012;165:366–7.22884590
11 Baccioglu A, Kalpaklioglu AF. Successful pregnancy outcome after treatment with C1-inhibitor concentrate in a patient with hereditary angioedema. Allergy 2014;69 (Suppl 99):493–4. doi:10.1111/all.12478
12 Andarawewa S, Aygören-Pürsün E. Subcutaneous C1-inhibitor concentrate for prophylaxis during pregnancy and lactation in a patient with C1-INH-HAE. Clin Case Rep 2021;9:1273–5.33768824
13 Staubach-Renz P. Subcutaneous C1-esterase inhibitor therapy throughout pregnancy and breastfeeding in a patient with hereditary angioedema: A case report. Allergy 2021;76:421. doi:10.1111/all.15095

## Substance Identification

### Substance Name

C1 Esterase Inhibitor

### CAS Registry Number

80295-38-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complement C1 Inactivator Proteins